# Difluprednate

CASRN: 23674-86-4

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the ophthalmic use of difluprednate during breastfeeding. Because absorption from the eye is limited, ophthalmic difluprednate would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Prednisolone

## Substance Identification

### Substance Name

Difluprednate

### CAS Registry Number

23674-86-4

### Drug Class

- Breast Feeding
- Lactation
- Anti-Inflammatory Agents
- Corticosteroids, Ophthalmic
- Glucocorticoids